# Glycolic Acid

CASRN: 79-14-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of glycolic acid (hydroxyacetic acid) on the skin during breastfeeding. Because it is unlikely to be appreciably absorbed or appear in breastmilk, it is considered safe to use during breastfeeding.[1,2] Avoid application to areas of the body that might come in direct contact with the infant's skin or where the drug might be ingested by the infant via licking.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Jiang M, Qureshi SA. (1998). Assessment of in vitro percutaneous absorption of glycolic acid through human skin sections using a flow-through diffusion cell system. J Dermatol Sci.
2 Lee KC, Korgavkar K, Dufresne RG, et al. (2013). Safety of cosmetic dermatologic procedures during pregnancy. Dermatol Surg.

## Substance Identification

### Substance Name

Glycolic Acid

### CAS Registry Number

79-14-1

### Drug Class

Breast Feeding

Lactation

Dermatologic Agents

Keratolytic Agents